# Riluzole

CASRN: 1744-22-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of riluzole up to 100 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Until more data are available, use riluzole with caution, particularly when breastfeeding a newborn.

### Drug Levels

Maternal Levels. A woman who was breastfeeding her 18-month-old infant 3 to 4 times a day was diagnosed with amyotrophic lateral sclerosis and started on riluzole 50 mg twice daily by mouth. On the third day of therapy, milk samples were collected before and at 1, 2, 4, 8, and 12 hours after the first dose of the day. The pre-dose sample contained 33.8 mcg/L of riluzole. The peak concentration in milk was 229.5 mcg/L at 2 hours after the dose. The average milk concentration was 94.4 mcg/L over the 12-hour collection time, which would provide the infant with an estimated daily dosage 14.1 mcg/kg. Based on the 12-hour collection period, the maternal weight-adjusted dosage was 0.8%. Riluzole metabolites were not measured.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Datta P, Rewers-Felkins K, Aurora N, et al. (2018). Estimation of riluzole levels in human milk and infant exposure during its use in a patient with ALS. J Hum Lact.

## Substance Identification

### Substance Name

Riluzole

### CAS Registry Number

1744-22-5

### Drug Class

Breast Feeding

Lactation

Excitatory Amino Acid Antagonists

Neuroprotective Agents